# Dothiepin

CASRN: 113-53-1

## Drug Levels and Effects

### Summary of Use during Lactation

Dothiepin is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Limited information indicates that maternal doses of up to 225 mg daily produce low levels in milk and breastfed infants' serum, and cause no adverse developmental consequences. Dothiepin would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months.

### Drug Levels

Dothiepin is metabolized to northiaden (nordothiepin), dothiepin-S-oxide and northiaden-S-oxide. The metabolites are estimated to have activity of about 50% of dothiepin's.[1]

Maternal Levels. A woman was taking dothiepin 25 mg 3 times daily and clorazepate potassium 15 mg at bedtime. A breastmilk sample was obtained 3 hours after the second dose of the day. The dothiepin breastmilk concentration was 33 mcg/L. Another woman who had taken a total of 300 mg of dothiepin over 6 days had a breastmilk dothiepin concentration of 10 mcg/L, but sample collection time was not reported. Metabolites were not measured in either patient.[2]

Eight women who were receiving dothiepin for depression provided breastmilk samples immediately before and after breastfeeding using a breast pump. Maternal dosages ranged from 25 to 225 mg daily (0.38 to 4.5 mg/kg daily) and the duration of therapy ranged from 2 days to more than 5 years. Dothiepin and its metabolites, northiaden, dothiepin-S-oxide and northiaden-S-oxide were measured in milk. The authors calculated weight-adjusted percentages of maternal dosages as follows: 0.58% for dothiepin, 0.23% for nordothiepin, 2.47% for dothiepin-S-oxide and 1.17% for nordothiepin-S-oxide.[3]

Twenty lactating women were taking oral dothiepin once daily for depression in daily dosages of 75 mg to 225 mg. Milk samples were collected 10 to 14 hours after the previous dose of dothiepin which had been constant for at least 12 days. A total of 38 breastmilk samples were obtained because some women donated samples more than once. Dothiepin milk levels ranged from undetectable (<10 mcg/L) to 95 mcg/L and northiaden milk levels ranged from undetectable (<10 mcg/L) to 60 mcg/L with wide variability in both. No statistical difference was found between foremilk and hindmilk levels.[4]

Two mothers with depression who were taking dothiepin had milk samples taken 12 to 15 hours after their daily dose. Milk dothiepin levels were measured by gas chromatography. Foremilk levels were lower than hindmilk levels. The mother taking 225 mg daily had a foremilk level of 988 mcg/L and a hindmilk level of 1250 mcg/L. The second mother provided milk samples on 2 different dosages. While taking 50 mg daily, the foremilk level was 54 mcg/L and the hindmilk level was 198 mcg/L. While taking 100 mg daily, the foremilk level was 74 mcg/L and the hindmilk level was121 mcg/L.[5]

Infant Levels. Eight women who were receiving dothiepin for depression were breastfeeding their infants (extent not stated). Infant serum samples were obtained from 5 of the infants. One infant (maternal dosage 0.38 mg/kg daily for 7 days) had no detectable (<2 mcg/L) serum dothiepin or northiaden. In 4 other infants (maternal dosage range 0.95 to 4.5 mg/kg daily for 2 days to 5 years), only dothiepin-S-oxide and northiaden-S-oxide were measured, but not detectable (<10 mcg/L) in their plasma.[3]

Two breastfed (extent not stated) infants whose mothers were taking dothiepin (dosages not stated) had blood and urine samples measured for dothiepin and northiaden. One infant had plasma levels of 34 and 22 mcg/L, respectively, and urine levels of 19 and 15 mcg/L. The other infant had no detectable drug or metabolite in plasma or urine.[4]

Two mothers were breastfeeding (extent not stated) their infants while taking dothiepin. One was taking 50 mg daily and the other was taking 225 mg daily. Urine and blood samples were taken 12 to 15 hours after the mother's dose. Both infants had urine dothiepin concentrations of about 70 ng/L. The infant whose mother was taking 225 mg daily had a serum dothiepin concentration of 4.1 mcg/L, which was 0.16% of the maternal serum concentration. The other infant did not have a blood sample taken.[5]

### Effects in Breastfed Infants

Eight women who were receiving dothiepin for depression breastfed (extent not stated) their infants aged 0.13 to 12.5 months of age. Maternal dosages ranged from 25 to 225 mg daily (0.38 to 4.5 mg/kg daily). None of the infants had any noticeable adverse reactions.[3]

A retrospective, case-control study of 15 women who breastfed while taking dothiepin for depression compared the neurocognitive outcomes of their infants to those in a group of 15 depressed mothers who had not taken an antidepressant during breastfeeding and another 36 women without depression. The mothers in the dothiepin group had taken dosages of 150 to 225 mg daily for 4 to 134 weeks during breastfeeding. Infants had been exposed to dothiepin in breast milk at times from 3 to 152 weeks of age and were assessed at 3 to 5 years of age. There was no evidence of negative effects on the infants' development using a number of rating scales.[6]

Two infants were breastfed for 7 to 18 weeks during maternal use of dothiepin. The drug was started when both infants were 8 weeks of age. One mother started with a dose of 50 mg daily that was increased to 100 mg daily; she took dothiepin for 33 weeks during breastfeeding. The other mother was taking 225 mg daily and nursed her infant for 25 weeks during breastfeeding. Formal testing indicated no adverse effects on infant development up to 30 months of age.[5]

### Effects on Lactation and Breastmilk

Galactorrhea has been reported in one woman taking dothiepin.[7]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[8] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[9] None of the mothers were taking dothiepin.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[10]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Weissman AM, Levy BT, Hartz AJ, et al. Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
2 Rees JC, Glass RC, Sporne GA. Serum and breast milk concentration of dothiepin. Practitioner 1976;217:686.
3 Ilett KF, Lebedevs TH, Wojnar-Horton RE, et al. The excretion of dothiepin and its primary metabolites in breast milk. Br J Clin Pharmacol 1992;33:635-9.1389937
4 Buist A, Norman TR, Dennerstein L. Plasma and breast milk concentrations of dothiepin and northiaden in lactating women. Hum Psychopharmacol 1993;8:29-33.
5 Yoshida K, Smith B, Craggs M, et al. Investigation of pharmacokinetics and possible adverse effects in infants exposed to tricyclic antidepressants in breast-milk. J Affect Disord 1997;43:225-37.9186793
6 Buist A, Janson H. Effect of exposure to dothiepin and northiaden in breast milk on child development. Br J Psychiatry 1995;167:370-3.7496646
7 Gadd EM, Norris CM, Beeley L. Antidepressants and galactorrhoea. Int Clin Psychopharmacol 1987;2:361-3.3693875
8 Venkatesh KK, Castro VM, Perlis RH, et al. Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
9 Leggett C, Costi L, Morrison JL, et al. Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
10 Grzeskowiak LE, Saha MR, Nordeng H, et al. Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Dothiepin

### CAS Registry Number

113-53-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Tricyclic

Adrenergic Uptake Inhibitors